# Sotalol

CASRN: 3930-20-9

## Drug Levels and Effects

### Summary of Use during Lactation

Because of its extensive excretion into breastmilk and its renal excretion, other beta-adrenergic blocking drugs are preferred to sotalol, especially while nursing a newborn or preterm infant. Some authors recommend using sotalol during breastfeeding only while monitoring the infant closely for signs of beta-blockade.[1] Infant exposure is predicted to less after the infant is 4 weeks of age or older.

### Drug Levels

The excretion of beta-adrenergic blocking drugs into breastmilk is largely determined by their protein binding. Those with low binding are more extensively excreted into breastmilk.[1,2] Accumulation of the drugs in the infant is related to the fraction excreted in urine. With 0% protein binding, 80 to 90% renal excretion and a moderately long half-life, sotalol presents a high risk for accumulation in infants, especially neonates. It is estimated that a fully breastfed infant would receive 22% of the maternal weight-adjusted dosage of sotalol.[3]

Maternal Levels. Twenty milk samples from 5 mothers at various times during the first 7 days postpartum while taking sotalol 200 to 600 mg daily orally had average sotalol milk levels of 10.5 mg/L (range 4.8 to 20.2 mg/L).[4]

One woman taking sotalol 80 mg three times daily on day 5 postpartum had sotalol milk levels of 4.1 and 3.7 mg/L at 6.3 and 7 hours after a dose, respectively. She was restudied at 105 days postpartum while taking 80 mg twice daily. Her milk sotalol levels were 2.4 and 3.2 mg/L at 2.8 and 3.3 hours after a dose, respectively.[1]

A mother taking oral sotalol 80 mg twice daily had milk sotalol levels of 5 and 4.4 mg/L at 3 hours after the dose on days 5 and 7 postpartum.[5]

A physiologically based pharmacokinetic model of sotalol exposure during breastfeeding predicted that infants in the 90th percentile in height and weight had exposures about 20% higher than infants of the same age in the 10th percentile due to increased milk intake. The simulated infant exposures increased throughout the first 2 weeks of life and are maintained at the highest concentrations in weeks 2 to 4, with a consistent decrease observed as infants aged. Simulations suggest that breastfeeding infants will have plasma concentrations in the lower range observed in infants administered sotalol directly. Infant sex and frequency of nursing had minimal effects on exposure.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A study of mothers taking beta-blockers during nursing found a numerically, but not statistically significant increased number of adverse reactions in those taking any beta-blocker. Although the ages of infants were matched to control infants, the ages of the affected infants were not stated. One of the mothers was taking sotalol.[7]

Bradycardia was not seen in one 12-day-old infant who was breastfed from birth during maternal use of 600 mg of sotalol daily.[4] In another breastfed infant whose mother was taking 80 mg 2 to 3 times daily for more than 3 months, no bradycardia was seen and developmental milestones were achieved normally.[1]

Beta-adrenergic blocking drugs with similar breastmilk excretion characteristics and renal elimination have caused adverse effects in breastfed newborns.[8,9]

A prospective study of pregnant patients taking a beta-blocker asked mothers to complete a questionnaire about postpartum breastfeeding and any side effects in their breastfed infants. One mother reported taking sotalol in an unreported dosage while breastfeeding. She reported weak sucking in her infant.[10]

### Effects on Lactation and Breastmilk

Relevant published information on the effects of beta-blockade or sotalol during normal lactation was not found as of the revision date. A study in 6 patients with hyperprolactinemia and galactorrhea found no changes in serum prolactin levels following beta-adrenergic blockade with propranolol.[11]

### Alternate Drugs to Consider

Propranolol, Labetalol, Metoprolol

### References

1 Hackett LP, Wojnar-Horton RE, Dusci LJ, et al. Excretion of sotalol in breast milk. Br J Clin Pharmacol 1990;29:277-8.2306424
2 Riant P, Urien S, Albengres E, et al. High plasma protein binding as a parameter in the selection of betablockers for lactating women. Biochem Pharmacol 1986;35:4579-81.2878668
3 Atkinson HC, Begg EJ, Darlow BA. Drugs in human milk: Clinical pharmacokinetic considerations. Clin Pharmacokinet 1988;14:217-40.3292101
4 O'Hare MF, Murnaghan GA, Russell CJ, et al. Sotalol as a hypotensive agent in pregnancy. Br J Obstet Gynaecol 1980;87:814-20.7426541
5 Wagner X, Jouglard J, Moulin M, et al. Coadministration of flecainide acetate and sotalol during pregnancy: Lack of teratogenic effects, passage across the placenta, and excretion in human breast milk. Am Heart J 1990;119:700-2.1689933
6 Pressly MA, Schmidt S, Guinn D, et al. Informing a comprehensive risk assessment of infant drug exposure from human milk: Application of a physiologically based pharmacokinetic lactation model for sotalol. J Clin Pharmacol 2023;63 Suppl 1:S106-s16.37317500
7 Ho TK, Moretti ME, Schaeffer JK, et al. Maternal beta-blocker usage and breast feeding in the neonate. Pediatr Res 1999;45 (4, pt. 2):67A. doi:10.1203/00006450-199904020-00402
8 Boutroy MJ, Bianchetti G, Dubruc C, et al. To nurse when receiving acebutolol: Is it dangerous for the neonate? Eur J Clin Pharmacol 1986;30:737-9.3770068
9 Schimmel MS, Eidelman AI, Wilschanski MA, et al. Toxic effects of atenolol consumed during breast feeding. J Pediatr 1989;114:476-8.2921694
10 Freppel R, Gaboriau L, Richardson M, et al. Beta-blockers and breastfeeding: A real-life prospective study. Eur J Clin Pharmacol 2024;80:1937-43.39259357
11 Board JA, Fierro RJ, Wasserman AJ, et al. Effects of alpha- and beta-adrenergic blocking agents on serum prolactin levels in women with hyperprolactinemia and galactorrhea. Am J Obstet Gynecol 1977;127:285-7.556882

## Substance Identification

### Substance Name

Sotalol

### CAS Registry Number

3930-20-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Adrenergic Beta-Antagonists

Antiarrhythmics